# Teicoplanin

CASRN: 61036-62-2

## Drug Levels and Effects

### Summary of Use during Lactation

Teicoplanin is not approved for marketing in the United States by the U.S. Food and Drug Administration, but is available in other countries. Limited data indicate that teicoplanin is poorly excreted into breastmilk. Because teicoplanin is not orally absorbed it is unlikely to adversely affect the breastfed infant. One infant was safely breastfed during maternal therapy with teicoplanin and ceftriaxone. Until more information becomes available, monitor the breastfed infant for gastrointestinal disturbances such as diarrhea, particularly in newborn and preterm infants.

### Drug Levels

Maternal Levels. A woman who was 2 months postpartum was given teicoplanin 500 mg twice daily for an infected fistula. The drug was discontinued after 3 doses and a sample of milk from a complete emptying of the breast was taken 19 hours after the third dose. The concentration of the A2-2 component of teicoplanin in breastmilk was 0.94 mg/L. The authors estimated that this would represent a dose to the infant of 141 mcg/kg daily or about 1.4% of the maternal weight-adjusted dosage. However, if the other components of teicoplanin distribute into milk similarly, these values could be approximately doubled.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A mother who was exclusively nursing her 52-day-old infant developed a soft-tissue infection. She was treated with intravenous teicoplanin 400 mg every 12 hours for 3 doses, then 400 mg daily for 5 days total, intravenous ceftriaxone 1 gram daily, and topical mupirocin cream twice daily. A careful follow-up indicated that her infant had no adverse effects.[2]

### Alternate Drugs to Consider

Vancomycin

### References

1 Fraissinet F, Lesourd M, Naudoux N, et al. (2017). Pharmacokinetics of teicoplanin in a breastfeeding mother. Breastfeed Med.
2 Kaplan YC, Keskin-Arslan E, Acar S, et al. (2017). Teicoplanin use during breastfeeding. Breastfeed Med.

## Substance Identification

### Substance Name

Teicoplanin

### CAS Registry Number

61036-62-2

### Drug Class

Breast Feeding

Lactation

Antibacterial Agents

Anti-Infective Agents

Glycopeptides